# Aztreonam

CASRN: 78110-38-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that aztreonam produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush, have been reported with beta-lactams, but these effects have not been adequately evaluated. A task force respiratory experts from Europe, Australia and New Zealand found that aztreonam is compatible with breastfeeding.[1] Aztreonam is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. After a single intramuscular dose of aztreonam 1 gram in 6 women, peak milk levels averaging 0.3 mg/L occurred 6 hours after the dose. In 6 other women given a single 1 gram dose of aztreonam intravenously, peak milk levels averaged 0.2 mg/L at 2.4 hours after the dose. Aztreonam was detectable (detection limit 0.09 mg/L) in milk between 2 and 8 hours after the intramuscular dose and 1.5 and 8 hours after the intravenous dose.[2,3]

After a single intravenous dose of aztreonam 1 gram, milk levels ranging from 0.4 to 1 mg/L occurred 1 to 5 hours after the dose in 10 women with little variation in milk levels during this time in each woman. On average, levels were slightly higher 2 hours after the dose, but in individuals the peak level occurred at various times between 1 and 4 hours.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Middleton PG, Gade EJ, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208 31699837
2 Fleiss PM, Devlin R, Richwald G, et al. Aztreonam excretion in human milk. Clin Pharmacol Ther 1984;35:240.doi:10.1038/clpt.1984.32
3 Fleiss PM, Richwald GA, Gordon J, et al. Aztreonam in human serum and breast milk. Br J Clin Pharmacol 1985;19:509-11 4039600
4 Ito K, Hirose R, Tamaya T, et al. Pharmacokinetic and clinical studies of aztreonam in the perinatal period. Jpn J Antibiot 1990;43:719-26 2381040

## Substance Identification

### Substance Name

Aztreonam

### CAS Registry Number

78110-38-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Monobactams